# Tattooing

## Drug Levels and Effects

### Summary of Use during Lactation

No data are available on the safety of tattooing during breastfeeding. Theoretical concerns relate to transmission of pigments or infections to the infant during breastfeeding and in the United States, blood donation is not permitted for 12 months after a tattoo as a precaution. Opinion appears to favor not obtaining a new tattoo during breastfeeding.[1-3] Tattooing of the nipple-areola area is sometimes used as part of nipple reconstruction in plastic surgery.[2,4]

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Farley CL, Van Hoover C, Rademeyer CA. (2019). Women and tattoos: Fashion, meaning, and implications for health. J Midwifery Womens Health.
2 Kluger N, De Cuyper C. (2018). A practical guide about tattooing in patients with chronic skin disorders and other medical conditions. Am J Clin Dermatol.
3 Roche-Paull R. (2015). Body modifications and breastfeeding: What you need to know. J Hum Lact.
4 Boccola MA, Savage J, Rozen WM, et al. (2010). Surgical correction and reconstruction of the nipple-areola complex: current review of techniques. J Reconstr Microsurg.

## Substance Identification

### Substance Name

Tattooing

### Drug Class

Breast Feeding

Lactation

Body Modification, Non-Therapeutic